# Azilsartan

CASRN: 147403-03-0

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of azilsartan during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Candesartan, Captopril, Benazepril, Enalapril, Lisinopril, Quinapril, Valsartan

## Substance Identification

### Substance Name

Azilsartan

### CAS Registry Number

147403-03-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Angiotensin II Type 1 Receptor Blockers

Angiotensin Receptor Blockers